# Mefenamic Acid

CASRN: 61-68-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with mefenamic acid during breastfeeding and it is potentially toxic, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Ten postpartum women received a 500 mg loading dose of mefenamic acid followed by 250 mg orally 3 times daily through the fourth postpartum day. Mefenamic acid and its metabolites were measured using an old, insensitive assay method. Milk samples taken 2 hours after the first dose of each day found average mefenamic acid milk levels of 170 mcg/L (range 30 to 660 mcg/L), although these levels might be inaccurate because the concentration measured in blank milk samples in this study was 200 mcg/L and potentially active metabolites were not measured.[1]

Infant Levels. Ten postpartum women received a 500 mg loading dose of mefenamic acid followed by 250 mg orally 3 times daily. Infant serum and urine specimens were obtained one hour after nursing on the afternoon of the fourth day. Only 3 of the 10 infants had blood levels at or above the blank level of the assay (10 mg/L). Average urine recovery was similar to the blank level. Five of the 10 infants had urine levels greater than blank urine.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Buchanan RA, Eaton CJ, Koeff ST, et al. The breast milk excretion of mefenamic acid. Curr Ther Res 1968;10:592-6 4973976

## Substance Identification

### Substance Name

Mefenamic Acid

### CAS Registry Number

61-68-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Antii-nflammatory Agents, Nonsteroidal